# Levonorgestrel Implant

CASRN: 797-63-7

## Drug Levels and Effects

### Summary of Use during Lactation

This record contains information specific to the levonorgestrel implant, which is not available in the United States. Although nonhormonal methods are preferred during breastfeeding, progestin-only contraceptives such as levonorgestrel are considered the hormonal contraceptives of choice during lactation. Fair quality evidence indicates that levonorgestrel does not adversely affect the composition of milk, the growth and development of the infant. Expert opinion and a metanalysis hold that the risks of progestin-only contraceptive products usually are acceptable for nursing mothers at any time postpartum.[1-5] A meta-analysis that immediate postpartum progestin contraceptive implant insertion (etonogestrel or levonorgestrel) does not interfere with lactogenesis, and does not reduce breastfeeding continuation at three or six months.[6] Some evidence indicates that progestin-only contraceptives may offer protection against bone mineral density loss during lactation, or at least do not exacerbate it.[7-9]

### Drug Levels

Levonorgestrel is a synthetic progestin that is the active isomer of the racemate norgestrel. It is considered to be twice as potent on a weight basis as the racemic mixture.

Maternal Levels. One hundred women who received Norplant implants at an average of day 55 postpartum were compared to 100 women receiving a postpartum nonhormonal IUD. Milk levonorgestrel levels were measured at various times after insertion. During days 1 to 4 postinsertion, average milk levels were 0.079 mcg/L (n = 5); during days 9 to 14, average levels were 0.128 mcg/L (n = 22); during days 16 to 22, average levels were 0.163 mcg/L (n = 3); and during days 34 to 40, average levels were 0.116 mcg/L (n = 21). The authors estimated that a fully breastfed infant would receive a levonorgestrel dosage of 15 to 18 ng/kg daily in breastmilk during this time period.[6]

A study compared women who received Norplant-2 (n = 14), an IUD that released 20 mcg levonorgestrel daily (n = 14) or oral tablets containing 30 mcg of levonorgestrel (n = 10) at 4 to 6 weeks postpartum. Pooled fore- and hindmilk samples were measured several times on the first day of drug use and periodically thereafter until day 28. Norplant-2 users had milk levels that reached an average of 0.067 mcg/L by day 2 and maintained those levels throughout the 28 days. IUD users had milk levels that reached an average of 0.046 mcg/L by day 2 and maintained those levels throughout the 28 days. Oral tablet users had 2-hour peak milk levels that averaged 0.05 mcg/L throughout the 28 days.[7]

Infant Levels. Forty-two women received Norplant implants between days 30 and 40 postpartum. The women breastfed for 1 year and donated 1 blood sample from herself and her infant once during the year. Infant serum levels averaged 1.5 mcg/L during the first month postpartum (n = 10); 3.95 mcg/L during the third month postpartum (n = 3); 4.2 mcg/L during the sixth month postpartum (n = 12); 2.5 mcg/L during the ninth month postpartum (n = 8); and 3.6 mcg/L during the twelfth month postpartum (n = 11). Overall, the infants' serum levonorgestrel levels averaged 9.9% (range 4.9 to 12.6%) of simultaneous maternal serum levels.[8]

A study compared women who received levonorgestrel as a contraceptive via Norplant-2 (n = 14), an IUD that released 20 mcg daily (n = 14) or oral tablets containing 30 mcg of levonorgestrel (n = 10) at 4 to 6 weeks postpartum. The serum levels of infants averaged 0.046 mcg/L in infants whose mothers used Norplant-2. Infant serum levels averaged 2.9 to 4.6%, of maternal serum levels with Norplant-2.[7]

### Effects in Breastfed Infants

Numerous studies have found no systematic differences in growth, development or illness rates between the infants of mothers who received Norplant as a contraceptive and those of other mothers receiving either no contraception or nonhormonal contraception.[6,9-13] One study found serum thyroid stimulating hormone levels to be lower in the infants exposed to levonorgestrel than in control infants.[14]

Ten women received Norplant-2 beginning at 4 weeks postpartum. Mothers collected 4-hour urine samples daily from weeks 4 to 11 postpartum from their infants. Urine samples were analyzed for follicle-stimulating hormone, luteinizing hormone and testosterone. No difference was found in these levels when compared to those of infants whose mothers were taking either no contraception or an oral progestin-only contraceptive containing 30 mcg of levonorgestrel.[15]

Multicenter, nonrandomized studies followed infants whose mothers received levonorgestrel contraception during breastfeeding, either as oral tablets of 37.5 mcg daily (n = 246) or as Norplant (n = 453). No adverse effects on infant growth through the first year were found in comparison to standard measurements.[16,17] In a continuation study, infants from these studies who were exposed to levonorgestrel via Norplant (total n = 220) were followed up to 6 years of age. Infants were fully breastfed for an average of 7.8 months and were breastfed at least once daily for an average of 16.5 months. No differences in growth, diseases, surgery or hospitalizations were found from years 2 through 6 between infants whose mothers used levonorgestrel implants or Copper T IUD. An increase in skin conditions occurred in the levonorgestrel group and an increase in urogenital conditions occurred in the Copper T group.[13]

### Effects on Lactation and Breastmilk

Numerous studies of varying size and quality have found that the use of levonorgestrel implants (Norplant or Norplant-2) as a contraceptive beginning at 7 days postpartum or later either has no clinically important negative effect on the quality of breastmilk and results in either no effect or an increase in the milk supply and duration of lactation.[10,12,18-22]

In a nonrandomized study, 100 women who received Norplant implants at an average of day 55 postpartum were compared to 100 women receiving a postpartum IUD. No differences were found between the control and Norplant groups in the number of women nursing at days 10 and 20 and months 1 to 12 postinsertion except a slight decrease in the number of mothers using Norplant who were exclusively breastfeeding at 12 months. No difference since the time of weaning was noted between the groups.[6]

A secondary analysis of a study in Uganda examined 96 postpartum women randomized to receive a 2-rod levonorgestrel implant (Jadelle, Bayer AG, Berlin) either within 5 days of birth (n = 55) or at 6 to 8 weeks postpartum (n = 42). No differences were found between the groups in infant growth from birth to 6 months, time to lactogenesis II, or proportion of mothers breastfeeding at 3 and 6 months.[23]

A study in Malawi compared the breastfeeding rates between women who received an etonogestrel (n = 28) or levonorgestrel (n= 112) implant immediately postpartum. Mothers chose the method and were followed for 2 years postpartum. Most women breastfed for 2 years. No difference was seen in the exclusive breastfeeding rate at 6 months between the groups nor in the continuation of breastfeeding to 2 years.[24]

### Alternate Drugs to Consider

Etonogestrel, Intrauterine Copper Contraceptive, Medroxyprogesterone Acetate, Norethindrone

### References

1 World Health Organization. Medical Eligibility Criteria For Contraceptive Use: Fifth Ed. 2015.https://www.who.int/publications/i/item/9789241549158
2 American College of Obstetrics and Gynecology. Committee Opinion No. 670: Immediate Postpartum Long-Acting Reversible Contraception. Obstet Gynecol 2016;128:e32-7 27454734
3 Vricella LK, Gawron LM, Louis JM. Society for Maternal-Fetal Medicine (SMFM) Consult Series #48: Immediate postpartum long-acting reversible contraception for women at high-risk for medical complications. Am J Obstet Gynecol 2019;220:B2-B12 30738885
4 Abdelhakim AM, Sunoqrot M, Amin AH, et al. The effect of early vs. delayed postpartum insertion of the LNG-IUS on breastfeeding continuation: A systematic review and meta-analysis of randomised controlled trials. Eur J Contracept Reprod Health Care 2019;24:327-36 31517549
5 Nguyen AT, Curtis KM, Tepper NK, et al. U.S. Medical Eligibility Criteria for Contraceptive Use, 2024. MMWR Recomm Rep 2024;73:1-126 39106314
6 Díaz S, Herreros C, Juez G, et al. Fertility regulation in nursing women: VII. Influence of Norplant levonorgestrel implants upon lactation and infant growth. Contraception 1985;32:53-74 3931973
7 Shikary ZK, Betrabet SS, Patel ZM, et al. ICMR task force study on hormonal contraception. Transfer of levonorgestrel (LNG) administered through different drug delivery systems from the maternal circulation into the newborn infant's circulation via breast milk. Contraception 1987;35:477-86 3113823
8 Shaaban MM, Odlind V, Salem HT, et al. Levonorgestrel concentrations in maternal and infant serum during use of subdermal levonorgestrel contraceptive implants, Norplant by nursing mothers. Contraception 1986;33:357-63 3089681
9 Abdulla KA, Elwan SI, Salem HS, et al. Effect of early postpartum use of the contraceptive implants, Norplant, on the serum levels on immunoglobulins of the mothers and their breastfed infants. Contraception 1985;32:261-6 3936675
10 Shaaban MM, Salem HT, Abdullah KA. Influence of levonorgestrel contraceptive implants, Norplant, initiated early postpartum upon lactation and infant growth. Contraception 1985;32:623-35 3937665
11 Affandi B, Karmadibrata S, Prihartono J, et al. Effect of Norplant on mothers and infants in the postpartum period. Adv Contracept 1986;2:371-80 3105266
12 Díaz S, Zepeda A, Maturana X, et al. Fertility regulation in nursing women IX. Contraceptive performance, duration of lactation, infant gowth, and bleeding patterns during use of progesterone vaginal rings, progestin-only pills, Norplant® implants, and Copper T 380-A intrauterine devices. Contraception 1997;56:223-32 9408703
13 Schiappacasse V, Díaz S, Zepeda A, et al. Health and growth of infants breastfed by Norplant contraceptive implants users: a six-year follow-up study. Contraception 2002;66:57-65 12169382
14 Bassol S, Nava-Hernandez MP, Hernandez-Morales C, et al. Effects of levonorgestrel implant upon TSH and LH levels in male infants during lactation. Int J Gynaecol Obstet 2002;76:273-7 11880130
15 Shikary BK, Betrabet SS, Toddywala VS, et al. Pharmacodynamic effects of levonorgestrel (LNG) administered either orally or subdermally to early postpartum lactating mothers on the urinary levels of follicle stimulating hormone (FSH), luteinizing hormone (LH) and testosterone (T) in their breast-fed male infants. Contraception 1986;34:403-12 3096635
16 Anon. Progestogen-only contraceptives during lactation: I. Infant growth. World Health Organization Task force for Epidemiological Research on Reproductive Health; Special Programme of Research, Development and Research Training in Human Reproduction. Contraception 1994;50:35-53 7924321
17 Anon. Progestogen-only contraceptives during lactation: II. Infant development. World Health Organization, Task Force for Epidemiological Research on Reproductive Health; Special Programme of Research, Development, and Research Training in Human Reproduction. Contraception 1994;50:55-68 7924322
18 Sas M, Gellen JJ, Dusitsin N, et al. An investigation on the influence of steroidal contraceptives on milk lipid and fatty acids in Hungary and Thailand. WHO Special Programme of Research, Development and Research Training in Human Reproduction. Task Force on oral contraceptives. Contraception 1986;33:159-78 2938886
19 Anon. Effects of hormonal contraceptives on breast milk composition and infant growth. World Health Organization (WHO) Task Force on Oral Contraceptives. Stud Fam Plann 1988;19:361-9 2906764
20 McCann MF, Moggia AV, Higgins JE, et al. The effects of a progestin-only oral contraceptive (levonorgestrel 0.03 mg) on breast-feeding. Contraception 1989;40:635-48 2515939
21 Costa TH, Dorea JG. Concentration of fat, protein, lactose and energy in milk of mothers using hormonal contraceptives. Ann Trop Paediatr 1992;12:203-9 1381897
22 Chi IC, Robbins M, Balogh S. The progestin-only oral contraceptive--its place in postpartum contraception. Adv Contracept 1992;8:93-103 1519499
23 Averbach S, Kakaire O, McDiehl R, et al. The effect of immediate postpartum levonorgestrel contraceptive implant use on breastfeeding and infant growth: A randomized controlled trial. Contraception 2019;99:87-93 30408456
24 Krashin JW, Lemani C, Nkambule J, et al. A comparison of breastfeeding exclusivity and duration rates between immediate postpartum levonorgestrel versus etonogestrel implant users: A prospective cohort study. Breastfeed Med 2019;14:69-76 30508390

## Substance Identification

### Substance Name

Levonorgestrel Implant

### CAS Registry Number

797-63-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contraceptive Agents, Female